# Lurbinectedin

CASRN: 497871-47-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of lurbinectedin during breastfeeding. Because lurbinectedin is about 99% bound to plasma proteins, the amount in milk is likely to be low. Most sources consider that mothers receiving antineoplastic therapy should not breastfeed, especially with alkylating agents such as lurbinectedin.[1] The manufacturer recommends not to breastfeed during treatment and for 2 weeks after the last dose.

Chemotherapy may adversely affect the normal microbiome and chemical makeup of breastmilk.[2] Women who receive chemotherapy during pregnancy are more likely to have difficulty nursing their infant.[3]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Pistilli B, Bellettini G, Giovannetti E, . Chemotherapy, targeted agents, antiemetics and growth-factors in human milk: How should we counsel cancer patients about breastfeeding? Cancer Treat Rev 2013;39:207–11.23199900
2 Urbaniak C, McMillan A, Angelini M, . Effect of chemotherapy on the microbiota and metabolome of human milk, a case report. Microbiome 2014;2:24.25061513
3 Stopenski S, Aslam A, Zhang X, . After chemotherapy treatment for maternal cancer during pregnancy, is breastfeeding possible? Breastfeed Med 2017;12:91–7.28170295

## Substance Identification

### Substance Name

Lurbinectedin

### CAS Registry Number

497871-47-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Alkylating Agents